# Crizanlizumab

CASRN: 1690318-25-2

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available about crizanlizumab during breastfeeding. Because crizanlizumab is a large protein molecule with a molecular weight of about 146,000 Da, the amount in milk is likely to be very low. It is also likely to be partially destroyed in the infant's gastrointestinal tract and absorption by the infant is probably minimal. Waiting for at least 2 weeks postpartum to resume therapy may minimize transfer to the infant.[1] Until more data become available, crizanlizumab should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Krysko KM, Dobson R, Alroughani R, et al. (2023). Family planning considerations in people with multiple sclerosis. Lancet Neurol.

## Substance Identification

### Substance Name

Crizanlizumab

### CAS Registry Number

1690318-25-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antibodies, Monoclonal, Humanized